# Cannabis

CASRN: 8063-14-7

## Drug Levels and Effects

### Summary of Use during Lactation

The main psychoactive component of cannabis, tetrahydrocannabinol (THC), is excreted into breastmilk in small quantities. The duration of detection of THC in milk has ranged from 6 days to greater than 6 weeks in various studies. Computer modeling studies predicted a half-life in milk of 12 to 39 hours, which is consistent with a THC clearance from milk in 2.5 to 8 days. Concern has been expressed regarding the possible effects of cannabis on neurotransmitters, nervous system development and endocannabinoid-related functions.[1,2] A 1-year study found that daily or near daily use might retard the breastfed infant’s motor development, but not growth or intellectual development.[3] This and other studies[4,5] found that occasional maternal cannabis use during breastfeeding did not have any discernable effects on breastfed infants, but the studies were inadequate to rule out all long-term harm and were conducted at a time when cannabis had relatively low potency. A large registry study in Australia and New Zealand suggested that postnatal use of cannabis may increase the risk of autism spectrum disorder, with male infants affected to a greater extent than female infants. However, no information on the breastfeeding status of the mothers was presented.[6]

Cannabis can affect serum prolactin variably and it might decrease milk supply and the duration of lactation.[7,8] Mothers with the perception that their use of cannabis is harmful to their infants are likely to discontinue breastfeeding earlier than mothers who do not believe it is harmful.[9] One preliminary study found a decrease in secretory IgA (sIgA) levels in the milk of cannabis users.[10] Two studies found decreases in the lipid content of milk, but they had opposite findings on the effects on protein and carbohydrate content.[11,12] The clinical relevance of these changes is questionable. Cannabis seeds are reportedly used orally to increase milk production in Türkiye, but no valid scientific data exist for this use.[13] For information on cannabidiol (CBD), see the LactMed record on Cannabidiol.

Because of insufficient long-term data on the outcome of infants exposed to cannabis via breastmilk, health professionals’ opinions on the acceptability of breastfeeding by cannabis-using mothers varies. In general, professional guidelines recommend that cannabis use should be avoided by nursing mothers, and nursing mothers should be informed of possible adverse effects on infant development from exposure to cannabis compounds in breastmilk. Other factors to consider are the possibility of positive urine tests in breastfed infants, which might have legal implications, and the possibility of other harmful contaminants in street drugs. In addition to possible adverse effects from cannabinoids in breastmilk, paternal cannabis use may also increase the risk of sudden infant death syndrome in breastfed infants. Cannabis should not be smoked by anyone in the vicinity of infants because the infants may be exposed by inhaling the smoke.[14-17]

### Drug Levels

The main active psychoactive component of cannabis is delta-9-tetrahydrocannabinol (THC), although it also contains other active compounds. THC is very fat soluble and persistent in the body fat of users and slowly released over days to weeks, depending on the extent of use.

Maternal Levels. Two women who smoked marijuana daily while nursing had their randomly collected milk analyzed. One mother who reported smoking marijuana once daily had a milk tetrahydrocannabinol concentration of 105 mcg/L; other metabolites were below the level of quantification. The second mother who reported smoking marijuana 7 to 8 times daily had a milk THC concentration of 340 mcg/L; the metabolite 11-hydroxy-THC was found in a concentration of 4 mcg/L and 9-carboxy-THC was below the level of quantification. A milk sample that was collected 1 hour after smoking marijuana contained 60.3 mcg/L of THC, 1.1 mcg/L of 11-hydroxy-THC and 1.6 mcg/L of 9-carboxy-THC.[18] One source used data in this case to estimate that the infant receives about 0.8% of the maternal weight-adjusted dosage of THC.[19] However, a poorly characterized assay was used that might not be accurate and the portion of milk (i.e., foremilk versus hindmilk) that was collected by the mothers was not stated. This is important because of the high fat solubility of THC.

A woman who admitted to smoking cannabis (amount not stated) donated milk for analysis at an unknown time after the previous use. THC was present in a concentration of 86 mcg/L and 11-hydroxy-THC was present in a concentration of 5 mcg/L; 11-nor-carboxy-9-tetrahydrocannabinol was not detected.[20]

Eight exclusively nursing women who were 3 to 5 months postpartum and reported previous or current cannabis smoking were studied. After 24 hours of abstinence, each smoked a 100 mg of a standardized cannabis containing 23.18% THC. The product was smoked over 10 to 20 minutes from a glass pipe until it was fully consumed. Milk was pumped before smoking and at 20 minutes, 1, 2 and 4 hours after inhalation. THC and its metabolites, 11-OH-delta-9-tetrahydrocannabinol and 11-nor-9-carboxy-delta-9-tetrahydrocannabinol were measured in the milk samples. Six of the women had baseline THC concentrations of <2 mcg/L; the other two had 5.8 and 15.8 mcg/L of THC in their milk at baseline. The average THC concentration in breastmilk was 53.5 mcg/L (median 27.6 mcg/L; range 8.4 to 186.1 mcg/L), and the average peak THC concentration was 94 mcg/L (range 12.2 to 420.3 mcg/L) 1 hour after inhalation. The metabolites were not measurable (<0.097 mcg/L). The estimated daily THC intake for the infant was 8 mcg/kg, which corresponded to 2.5% (range 0.4 to 8.7%) of the weight-adjusted maternal dosage.[21]

Fifty women who reported using cannabis in the prior 14 days donated milk samples for analysis of THC and its major metabolites. Four women donated two samples each for a total of 54 samples. THC was detectable in 63% of the samples. The median concentration of THC was 9.47 mcg/L (range 1 to 323 mcg/L). Only 5 samples had measurable concentrations of 11-OH-THC (range 1.3 to 12.8 mcg/L), and 5 samples had measurable concentrations of cannabidiol (range 1.3 to 8.6 mcg/L). Samples collected 140 hours (about 6 days) or longer after reported use contained no detectable (<1 mcg/L) THC and the sample with the highest cannabidiol concentration contained no detectable THC. Of the 34 milk samples from mothers who reported using cannabis, the half-life of THC in milk was estimated to average about 27 hours.[22] Using the median value, the median infant THC dosage would be 1.4 mcg/kg daily.

Twenty women who admitted to using a cannabis product while breastfeeding their infants provided milk samples for analysis. The mothers reported using cannabis almost daily. Fifteen women provided milk samples at their infant’s 2-week and 2-month checkup and 5 provided a sample at only one of the visits for a total of 35 milk samples. All but one milk sample contained at least one cannabinoid. None of the mothers reported using a cannabidiol (CBD) product, but 13 had detectable CBD in breastmilk. Median concentrations in milk were as follows: THC 27.5 (IQR 0.8 to 190.5) mcg/L; 11-OH-THC 1.4 (IQR 0.7 to 5.2) mcg/L; THC-COOH 1.9 (IQR 0.5-16.6) mcg/L; CBD 1.2 (IQR 0.5 to 17) mcg/L. Three patients using edible products had similar cannabinoid levels as those who smoked cannabis. Fourteen mothers reported an increase in use of cannabis between the 2-week and 2-month visit. Median breast milk THC concentrations were 16.7 mcg/L at visit 1 and 54.5 mcg/L at visit 2. The authors estimated that overall the breastfed infants received an average THC dose of 4.12 mcg/kg daily (range 0.52 to 123 mcg/kg daily) in milk.[23]

Seven women who used cannabis during pregnancy more than twice weekly, primarily by smoking, and were documented to be abstinent postpartum donated blood and milk levels 2 to 5 times weekly for 6 to 7 weeks. Maximum milk THC levels ranged from 2.8 to 26.1 mcg/L and the elimination half-life from milk averaged 17 days (range 12.2 to 21 days).[24]

Ninety lactating persons (including 50 from reference [22]) who reported using cannabis within the prior 48 hours donated 104 milk samples to a milk biorepository. THC, 11-hydroxy-THC, 11-COOH-THC, cannabidiol, and cannabinol were measured in the samples. The median concentration of THC was 22.7 mcg/L (range 0.1 to 1620.0). The two main metabolites of THC, 11-OH-THC and 11-COOH-THC were detected in 22 (21.2%) and 84 (80.8%) of samples, respectively. Cannabidiol was measurable in 44 (42.3%) samples and cannabinol was measurable in 43 (41.3%) samples. The number of hours since last use, route of use and number of puffs taken were significant predictors of the log of THC concentrations.[25] These samples and previously reported pharmacokinetic values from children taking cannabidiol were used to create a physiologically based pharmacokinetic (PBPK) computer model of infant cannabidiol exposure from breastmilk with maternal cannabis use. Infant exposure was minimal compared to exposure from direct ingestion.[26]

Thirteen milk samples were collected from 12 women who reported cannabis use post-delivery, and one sample was collected from a woman who did not indicate the period of cannabis usage. Among the 14 samples, 13 milk samples had detectable levels of THC (median 22 mcg/L), 5 milk samples contained carboxy-THC levels (median 2.6 mcg/L), 3 milk samples contained 11-OH-THC levels (median 6 mcg/L), 2 milk samples contained cannabinol levels (median 7.15 mcg/L), and 1 milk sample contained 9.3 mcg/L of CBD.[10]

A physiologically based pharmacokinetic model of THC following smoking of cannabis predicted relative infant dose of 0.59, 0.71, 0.60, and 0.39% for infants up to 1, 3, 6, and 12 months old, respectively. The predicted half-life in milk was about 39 hours.[27]

Twenty lactating women who used cannabis products donated a baseline milk sample after a 12-hour abstention from cannabis, then they collected five additional milk samples at timed intervals of 30 to <40 minutes, 1 to <2 hours, 2 to <4 hours, 4 to <6 hours, and 8 to <12 hours after their own cannabis use. On the study day, 12 of the 20 participants used cannabis more than once. A total of 114 milk samples were submitted. Mean baseline milk THC concentration after the 12-hour abstention was 36.5 mcg/L. The time of the peak concentration in milk was 120 to 135 minutes after cannabis use, with considerable variability. The mean THC concentration in the study population after initial cannabis use was 104.4 mcg/L. The mean individual THC concentrations in milk after cannabis use ranged from 2.9 to 312.6 mcg/L. The half-life of THC in milk was estimated to be 11.45 hours. The estimated median infant THC dose was 5.7 mcg/kg daily. Other components measured included 11-nor-9-carboxy-delta-9-tetrahydrocannabinol, 11-hydroxy- delta-9-tetrahydrocannabinol, cannabinol, 7-hydroxy cannabidiol, cannabidiol, and 7-carboxycannabidiol.[28]

A study in 20 mothers who used cannabis found that the THC content of their milk was positively correlated with the fat content of their milk.[12] This finding is likely because of the high fat solubility of THC.

Fifty-seven breastmilk samples were collected postpartum from women enrolled in a study assessing usage behaviors of medical marijuana, non-medical marijuana, and CBD. Delta-9-THC was found in 19 samples containing an average concentration of 33.2 mcg/L, a median concentration of 7.9 mcg/L and a concentration range of 0.5 of 291 mcg/L. Cannabigerol was found in 7 samples in an average concentration of 3.1 mcg/L, a mean concentration of 1.0 mcg/L and a concentration range of 0.6 to 12.9 mcg/L. Delta-8-THC and cannabidiol were each found in one sample at a concentration of 0.8 mcg/L.[29]

Thirteen women with a positive urine screen for cannabis use had breastmilk samples collected at 24 hours, 48 hours, and one week after birth. Eleven of the mothers reported using an average of 1.45 joints per day during pregnancy and no cannabis use postpartum. Two continued to use cannabis in the postpartum period. Among the abstinent mothers, THC concentrations in breastmilk progressively decreased during the study period, with quantifiable levels observed in 40% of samples at 24 hours and 28% at 48 hours. All breastmilk samples were below the limit of quantification (<5 mcg/L) one week postpartum.[30]

Infant Levels. The urine of 2 breastfed infants whose mothers smoked marijuana did not contain detectable concentrations of the 9-carboxy-THC metabolite. One mother reported smoking marijuana once daily and the other reported smoking marijuana 7 to 8 times daily. Analysis of the feces of the latter mother’s infant revealed a higher proportion of metabolites than THC, indicating that THC was probably absorbed from the milk, metabolized by the infant, and excreted in feces.[18]

A 6-month-old infant was exclusively breastfed by a mother who was a chronic cannabis user. Specimens drawn 24 to 36 hours post-exposure showed carboxy-THC levels of 189 mcg/L in blood and 423 mcg/L in urine.[31]

A mother reported smoking about 4 cannabis resin joints daily sometimes just before breastfeeding. She reported starting when her breastfed infant was 4 months old. At 9 months of age after a tonic-clonic seizure, the infant’s plasma contained delta-9-THC 2.2 mcg/L, delta-9-THC-COOH 1.1 mcg/L, and 11-OH-THC 0.4 mcg/L.[32]

A PBPK pharmacokinetic model of THC following smoking of cannabis predicted that in the worst-case scenario of maternal cannabis use six times daily during lactation, the maximum infant plasma concentration ranged between 0.084 and 0.167 mcg/L for infants between 1 and 12 months. These concentrations were two orders of magnitude lower than maternal plasma levels. Neonates up to 1 month old had the highest THC exposure, probably because of the incomplete maturation of metabolizing enzymes.[27]

### Effects in Breastfed Infants

Twenty-seven mothers reported smoking marijuana during breastfeeding. Twelve of them smoked once a month or less, 9 smoked weekly, and 6 smoked daily. Six of their infants were compared at 1 year of age to the infants of mothers who did not smoke marijuana during pregnancy or breastfeeding. No differences were found in growth, or on mental and motor development.[4]

Sixty-eight infants whose mothers reported smoking marijuana during breastfeeding were compared to 68 matched control infants whose mothers did not smoke marijuana. The duration of breastfeeding varied, but the majority of infants were breastfed for 3 months and received less than 16 fluid ounces of formula daily. Motor development of the marijuana-exposed infants was slightly reduced in a dose-dependent (i.e., number of reported joints per week) manner at 1 year of age, especially among those who reported smoking marijuana on more than 15 days per month during the first month of lactation. No effect was found on mental development.[3]

A small, case-control study found that paternal marijuana smoking postpartum increased the risk of sudden infant death syndrome, implying adverse effects from non-breastfeeding exposures, such as second-hand smoke. In this study, too few nursing mothers smoked marijuana to form any conclusion.[33]

A study of women taking buprenorphine for opiate substitution during pregnancy and lactation found that 4 of the women were also using cannabis as evidenced by positive urine screens for THC between 29 and 56 days postpartum. One was also taking unprescribed benzodiazepines. One infant was exclusively breastfed and the other 3 were mostly breastfeeding with partial supplementation. Infants had no apparent drug-related adverse effects and showed satisfactory developmental progress.[34]

Fifty women who reported using cannabis in the prior 14 days donated milk samples for analysis of THC and its major metabolites. THC was detectable in 66% of the samples and below the limit of quantification in 32% of samples. In 4 evaluations between 4 to 36 months of age, no differences were found in infant adverse reactions, postnatal growth, or neurodevelopmental outcomes from between the groups with quantifiable and nonquantifiable THC in breastmilk.[35]

A 6-month-old infant was exclusively breastfed by a mother who was a chronic cannabis user. She presented to the emergency department with somnolence after falling off a couch and developing seizure-like activity and minimally responsive dilated pupils. Laboratory values and a head CT scan were normal except for carboxy-THC found in urine and blood. The infant returned to baseline in 72 hours.[31]

A 9-month-old girl was hospitalized for a first tonic-clonic seizure. Brain scan and magnetic resonance imaging showed nonspecific right focal frontal cortical hypodensity, without bleeding or traumatic lesion. The electroencephalogram was normal, and no infection was found. Delta-9-THC, delta-9-THC-COOH and 11-OH-THC were found in the infant’s blood. Diazepam and its metabolites were also found in the infant’s blood and the urine screening found cotinine. Her mother explained she smoked cannabis resin since her child was 4 months old, sometimes just before breastfeeding, and on average 5 joints daily. Since then, her child had three episodes of “spasms”. She did not report any cannabis or other drug use during pregnancy. Breastfeeding was replaced by formula and 1.5 months later, the child had not had a recurrence.[32] The infant’s symptoms were probably caused by cannabis, but direct exposure to cannabis smoke and diazepam and tobacco use could have contributed.

The infant of a woman who used cannabis edibles for anxiety during pregnancy and during breastfeeding had several episodes of apnea. At 1 week of age while undergoing treatment for a urinary tract infection, the infant required intubation because of apneic episodes. At 5 weeks of age, the mother noticed the infant was having irregular breathing and apneic episodes and took the infant to the hospital. There the infant was having more apneic episodes and had urine positive for THC, although the mother reported not using cannabis for the prior 3 days.[36]

A prospective study followed 199 pregnant women and their infants from 24 weeks of pregnancy to 3 years postpartum. THC was measured in maternal urine at about 27 weeks of gestation. At 3 years of age, children with prenatal exposure to THC experienced a more rapid increase in body mass index than children with no exposure, independent of prenatal or postnatal exposure to tobacco. However, infants who were breastfed for 5 months or longer had weight gains similar to nonexposed infants.[37]

An 8-month-old breastfed infant whose mother smoked cannabis “wax” chronically presented to the ED with altered mental status. The infant had nursed 4 to 5 hours after the previous maternal cannabis use. On day 2 of hospitalization, it was discovered that the infant had ileocolic intussusception, which required laparotomy for reduction. The infant had an unremarkable recovery. Because intussusception has been reported in chronic users of cannabis, the authors suspected that cannabis might have caused it in the infant. The intussusception was possibly related to ingestion of cannabis in breastmilk.[38]

A retrospective study from 2013 to 2019 in an academic medical center, 1,520 infants whose mothers had a positive urine test for cannabis were studied. Of these, 818 (54%) were not breastfed and 702 (46%) were breastfed. Developmental outcomes did not differ by breastfeeding status among infants with prenatal cannabis exposure.[5]

### Effects on Lactation and Breastmilk

Acute one-time marijuana smoking suppresses serum concentrations of luteinizing hormone and prolactin in nonpregnant, nonlactating women.[39-41] The effects of long-term use is unclear, with some studies finding no effect on serum prolactin.[42-44] However, hyperprolactinemia has been reported in some chronic cannabis users,[45-47] and galactorrhea and hyperprolactinemia were reported in a woman who smoked marijuana for over 1 year.[47] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Of 258 mothers who reported smoking marijuana during pregnancy, 27 who had smoked marijuana during breastfeeding were followed-up at 1 year. No difference was found in the age of weaning between these mothers and 35 who reported not smoking marijuana during pregnancy or breastfeeding.[4]

The US state of Colorado legalized medical cannabis in 2001 and recreational cannabis in 2012. A cross-sectional survey conducted in Colorado in 2014 and 2015 found that both prenatal and postnatal cannabis use were associated with a shorter duration of breastfeeding. Among women who reported using cannabis during pregnancy, 64% breastfed for 9 or more weeks compared with 78% of women who did not use cannabis during pregnancy. Among women who reported postpartum cannabis use, 58% breastfed for 9 or more weeks compared with 79% of women who did not use cannabis postpartum. Both differences were statistically significant.[48]

A study using a database of 4969 postpartum women found that those who reported using marijuana were more likely to smoke cigarettes, experience postpartum depressive symptoms, and breastfeed for less than 8 weeks.[49] Tobacco smoking is known to decrease the duration of breastfeeding, so the effect of marijuana is not clear. Most of the women who smoked marijuana postpartum also used it during pregnancy.

Among a group of 14 women who used cannabis postpartum by inhalation, lactose levels were higher in the milk of cannabis users compared to the milk of non-users. The milk of cannabis users had lower levels of sIgA relative to non-users; however, when adjusted for BMI, there was no difference in sIgA levels between the groups. Subjects who used both cannabis and cigarettes had lower carbohydrate levels and greater crude protein and true protein levels in their milk. Cannabis-using mothers reported lower levels of milk production in the first, second, fourth, and sixth weeks postpartum, compared to non-users.[10]

An online survey of 1516 mothers who used cannabis during lactation found that 67% of participants were “not at all” concerned that cannabis use while breastfeeding affected their baby. Only 3% attributed symptoms in their infants to cannabis use; symptoms were perceived as positive or negative. Interestingly, 45% (n = 603) altered timing of cannabis use relative to breastfeeding to avoid exposing their infant to cannabis. Most mothers (85.8%) reported no changes in their milk supply when using cannabis compared to when they were not using it.[50]

Samples of breastmilk donated to a breastmilk repository by women (n = 165) who had consumed cannabis within the past 14 days and had cannabis metabolites in their milk were analyzed for carbohydrate, protein, and lipid concentrations as well as caloric density. These samples were compared to samples of milk from women (n = 472) who had no cannabis metabolites in their milk. Exposed women had higher levels of protein (mean 1.43 vs 1.19 mg/dL) and carbohydrate (median 1.43 vs 1.19 mg/dL) in their milk. Fat and energy content were not significantly different between the groups.[11]

Milk lipid, lactose and protein concentrations were compared in 20 mothers who used cannabis at least once a week (14 daily, 6 weekly) to the milk of 19 control mothers who did not use cannabis. After cannabis use, concentrations of lipids and 10 of the 39 identified fatty acids were lower in milk from cases compared to controls. Milk lactose levels increased over time in controls but not in cases. Protein levels were not different between groups at any timepoint. In milk produced by cases, THC levels were positively correlated with lipids and negatively correlated with lactose.[12]

### References

1 Schuel H, Burkman LJ, Lippes J, . N-acylethanolamines in human reproductive fluids. Chem Phys Lipids 2002;121:211-27.12505702
2 Fernández-Ruiz J, Gómez M, Hernández M, . Cannabinoids and gene expression during brain development. Neurotox Res 2004;6:389-401.15545023
3 Astley SJ, Little RE. Maternal marijuana use during lactation and infant development at one year. Neurotoxicol Teratol 1990;12:161-8.2333069
4 Tennes K, Avitable N, Blackard C, . Marijuana: Prenatal and postnatal exposure in the human. NIDA Res Monogr 1985;59:48-60.3929132
5 Nidey N, McAllister JM, Terplan M, . Breastfeeding and developmental outcomes in infants with prenatal cannabis exposure: A retrospective cohort study. Breastfeed Med 2026;21:225-8.41460678
6 Tadesse AW, Ayano G, Dachew BA, . Exposure to maternal cannabis use disorder and risk of autism spectrum disorder in offspring: A data linkage cohort study. Psychiatry Res 2024;337:115971.38788554
7 Castro-Navarro I, McGuire MA, Williams JE, . Maternal cannabis use during lactation and potential effects on human milk composition and production: A narrative review. Adv Nutr 2024;15:100196.38432590
8 Wymore EM, Wagner K, Gold C, . High stakes: Exploring the impact of cannabis use in pregnancy and lactation. Neoreviews 2025;26:e247-e63.40164212
9 Coy KC, Haight SC, Anstey E, . Postpartum marijuana use, perceptions of safety, and breastfeeding initiation and duration: An analysis of PRAMS data from seven states, 2017. J Hum Lact 2021;37:803-12.33586506
10 Josan C, Shiplo S, Fusch G, . Cannabis use during lactation may alter the composition of human breast milk. Pediatr Res 2023;93:1959-68.36195631
11 Narayanan P, Bertrand K, Waalen J, . The effect of cannabis consumption during lactation on the macronutrient concentrations in breast milk. Breastfeed Med 2024;20:33-41.39530127
12 Castro-Navarro I, Williams JE, Dussurget L, . Short-term effects of maternal cannabis use on human milk macronutrient composition: The Lactation and Cannabis (LAC) Study. Breastfeed Med 2026;21:193-201.41467985
13 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
14 Ryan SA, Ammerman SD, O’Connor ME. Marijuana use during pregnancy and breastfeeding: Implications for neonatal and childhood outcomes. Pediatrics 2018;142:e20181889.30150209
15 Metz TD, Borgelt LM. Marijuana use in pregnancy and while breastfeeding. Obstet Gynecol 2018;132:1198-210.30234728
16 Harris M, Schiff DM, Saia K, . Academy of Breastfeeding Medicine Clinical Protocol #21: Breastfeeding in the setting of substance use and substance use disorder (Revised 2023). Breastfeed Med 2023;18:715-33.37856658
17 ACOG Clinical Consensus No. 10: Cannabis Use During Pregnancy and Lactation. Obstet Gynecol 2025;146:600-11.40966737
18 Perez-Reyes M, Wall ME. Presence of delta 9-tetrahydrocannabinol in human milk. N Engl J Med 1982;307:819-20.6287261
19 Bennett PN. Drugs and human lactation, 2nd ed. Amsterdam: Elsevier; 1996.
20 Marchei E, Escuder D, Pallas CR, . Simultaneous analysis of frequently used licit and illicit psychoactive drugs in breast milk by liquid chromatography tandem mass spectrometry. J Pharm Biomed Anal 2011;55:309-16.21330091
21 Baker T, Datta P, Rewers-Felkins K, . Transfer of inhaled cannabis into human breast milk. Obstet Gynecol 2018;131:783-8.29630019
22 Bertrand KA, Hanan NJ, Honerkamp-Smith G, . Marijuana use by breastfeeding mothers and cannabinoid concentrations in breast milk. Pediatrics 2018;142:e20181076.30150212
23 Moss MJ, Bushlin I, Kazmierczak S, . Cannabis use and measurement of cannabinoids in plasma and breast milk of breastfeeding mothers. Pediatr Res 2021;90:861-8.33469174
24 Wymore EM, Palmer C, Wang GS, . Persistence of Δ-9-tetrahydrocannabinol in human breast milk. JAMA Pediatr 2021;175:632-4.33683306
25 Bertrand K, Honerkamp-Smith G, Momper J, . Concentration of THC, 11-OH-THC, 11-COOH-THC, CBD, and CBN in human milk from lactating persons who use cannabis or cannabis-derived products. Birth Defects Research 2022;114:435. doi:10.1002/bdr2.2021
26 Yeung C, Bertrand K, Best B, . Cannabidiol exposures in breastfed infants compared to children as predicted by physiologically based pharmacokinetic modeling. Clin Pharmacol Ther 2023;113 (Suppl 1):S37-S8. doi:10.1002/cpt.2835
27 Shenkoya B, Yellepeddi V, Mark K, . Predicting maternal and infant tetrahydrocannabinol exposure in lactating cannabis users: A physiologically based pharmacokinetic modeling approach. Pharmaceutics 2023;15:2467.37896227
28 Holdsworth EA, Berim A, Gang DR, . Human milk cannabinoid concentrations and associations with maternal factors: The Lactation and Cannabis (LAC) study. Breastfeed Med 2024;19:515-24.38695182
29 Ballotari M, Truver MT, Sojin NA, . Analysis of cannabinoids and semi-synthetic cannabinoids in authentic breastmilk samples by liquid chromatography-tandem mass spectrometry. J Anal Toxicol 2025;49:559-66.40418239
30 Sandonís M, Brik M, Ramirez C, . Breast milk Δ9-tetrahydrocannabinol in cannabis users during the postpartum period: Correlation between breast milk, maternal urine and saliva samples during early lactation. Front Psychiatry 2026;17:1816611.42454326
31 Mabey J, Roarke K, Neavyn MJ. Encanto! Elucidating new cannabinoid-associated neurotoxicity objectively. Clin Toxicol 2022;60:45-6. doi:10.1080/15563650.2022.2107776
32 Bouquet E, Pain S, Gambert-Abdel Rahman C, . Recreational cannabis use during breastfeeding is not without risk! Fundam Clin Pharmacol 2023;37:144-5. doi:10.1111/fcp.12908
33 Klonoff-Cohen H, Lam-Kruglick P. Maternal and paternal recreational drug use and sudden infant death syndrome. Arch Pediatr Adolesc Med 2001;155:765-70.11434841
34 Ilett KF, Hackett LP, Gower S, . Estimated dose exposure of the neonate to buprenorphine and its metabolite norbuprenorphine via breastmilk during maternal buprenorphine substitution treatment. Breastfeed Med 2012;7:269-74.22011128
35 Bertrand K, Borchelt J, Honerkamp-Smith G, . Infant adverse reactions, postnatal growth and neurodevelopmental outcomes in infants and toddlers breastfed by mothers who use marijuana. Birth Defects Res 2020;112:876. doi:10.1002/bdr2.1760
36 Kaplan EF, Link CN, Schmalzried S, . Association of cannabis with apneic episodes in a breastfed infant: A case study. Breastfeed Med 2024;19:490-3.38469628
37 Moore BF, Mueller NT, Perng W, . Impact of prenatal exposure to delta 9-tetrahydrocannabinol and cannabidiol on birth size and postnatal growth trajectories. Pediatr Obes 2025;20:e13187.39681476
38 Strickler L, Baker A, DeGonza H, . Intussusception in an infant chronically ingesting marijuana via breastfeeding. Breastfeed Med 2025;20:450-2.40080407
39 Mendelson JH, Mello NK, Ellingboe J. Acute effects of marihuana smoking on prolactin levels on human females. J Pharmacol Exp Ther 1985;232:220-2.3965692
40 Mendelson JH, Mello NK, Ellingboe J, . Marihuana smoking suppresses luteinizing hormone in women. J Pharmacol Exp Ther 1986;237:862-6.3012072
41 Murphy LL, Muñoz RM, Adrian BA, . Function of cannabinoid receptors in the neuroendocrine regulation of hormone secretion. Neurobiol Dis 1998;5 (6 Pt B):432-46.9974176
42 Block RI, Farinpour R, Schlechte JA. Effects of chronic marijuana use on testosterone, luteinizing hormone, follicle stimulating hormone, prolactin and cortisol in men and women. Drug Alcohol Depend 1991;28:121-8.1935564
43 Brown TT, Dobs AS. Endocrine effects of marijuana. J Clin Pharmacol 2002;42:90S-6S.12412841
44 Ranganathan M, Braley G, Pittman B, . The effects of cannabinoids on serum cortisol and prolactin in humans. Psychopharmacology (Berl) 2009;203:737-44.19083209
45 Olusi SO. Hyperprolactinaemia in patients with suspected cannabis-induced gynaecomastia. Lancet 1980;1:255.
46 Harmon J, Aliapoulios MA. Gynecomastia in marihuana users. N Engl J Med 1972;287:936.
47 Rizvi AA. Hyperprolactinemia and galactorrhea associated with marijuana use. Endocrinologist 2006;16:308-10. doi:10.1097/01.ten.0000250184.10041.9d
48 Crume TL, Juhl AL, Brooks-Russell A, . Cannabis use during the perinatal period in a state with legalized recreational and medical marijuana: The association between maternal characteristics, breastfeeding patterns, and neonatal outcomes. J Pediatr 2018;197:90-6.29605394
49 Ko JY, Tong VT, Bombard JM, . Marijuana use during and after pregnancy and association of prenatal use on birth outcomes: A population-based study. Drug Alcohol Depend 2018;187:72-8.29627409
50 Boerner Z, Natha C, Baker T, . Perceptions of cannabis use and its benefits and risks among breastfeeding mothers. Womens Health Rep (New Rochelle) 2024;5:412-23.39035146

## Substance Identification

### Substance Name

Cannabis

### CAS Registry Number

8063-14-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cannabinoids

Street Drugs